# Succinylcholine

CASRN: 306-40-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of succinylcholine during breastfeeding. Because it is rapidly eliminated and poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.[1,2] General anesthetic regimens that include succinylcholine for cesarean section caused a delay in the time to the first breastfeeding, but the part that succinylcholine played in this difference in outcome in unknown.

### Drug Levels

Succinylcholine is rapidly hydrolyzed in maternal plasma and has a short half-life of about 3 to 5 minutes. It is unlikely to be excreted into milk or absorbed orally by the infant because of its highly polar nature.[1]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized, but nonblinded, study in women undergoing cesarean section compared epidural anesthesia with bupivacaine to general anesthesia with intravenous thiopental 4 mg/kg and succinylcholine 1.5 mg/kg for induction followed by nitrous oxide and isoflurane. The time to the first breastfeed was significantly shorter (107 vs 228 minutes) with the epidural anesthesia than with general anesthesia. This difference was probably caused by the anesthesia's effects on the infant, because the Apgar and neurologic and adaptive scores were significantly lower in the general anesthesia group of infants.[3] It is not known what part succinylcholine played in this difference in outcome.

A nonrandomized, nonblinded study in a Serbian hospital of women near term who underwent cesarean section compared general anesthesia (n = 284) to spinal or epidural anesthesia (n = 249). Spinal anesthesia consisted of hyperbaric bupivacaine 12 mg and fentanyl 0.01 mg; epidural anesthesia consisted of isobaric bupivacaine 0.5% (0.5 mg per 10 cm height) and fentanyl 0.05 mg. General anesthesia consisted of propofol 2.3 mg/kg and succinylcholine 1.5 mg/kg for induction and intubation, followed by an anesthetic gas mixture and oxygen. Reportedly, nitric oxide (possibly nitrous oxide) was 50% of the gas before delivery and 67% after delivery. Sevoflurane was also used in some cases. After delivery and cord clamping, mothers received fentanyl 3 mcg/kg and rocuronium 0.5 mg/kg intravenously for placental delivery. After surgery, neuromuscular block reversal was performed with neostigmine and atropine. All patients received 1 mg/kg of diclofenac every 8 h for 24 hours after delivery and 98% of general anesthesia patients also received 100 mg of tramadol and 78.5% received acetaminophen 1 gram. No regional anesthesia patients received tramadol or acetaminophen. Patients receiving one of the regional anesthetic protocols established lactation sooner (56% and 29% after 18 and 24 hours, respectively), while 86% of women receiving general anesthesia did not establish lactation until 36 to 48 hours after surgery.[4] It is not known what part succinylcholine played in this difference in outcome.

### Alternate Drugs to Consider

Atracurium, Cisatracurium, Rocuronium

### References

1 Spigset O. Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand 1994;38:94-103.8171959
2 Howie WO, McMullen PC. Breastfeeding problems following anesthetic administration. J Perinat Educ 2006;15:50-7.17541461
3 Sener EB, Guldogus N, Karakaya D, et al. Comparison of neonatal effects of epidural and general anesthesia for cesarean section. Gynecol Obstet Invest 2003;55:41-5.12624551
4 Stanisic DM, Kalezic N, Rakic A, et al. Comparison of post-cesarean pain perception of general versus regional anesthesia, a single-center study. Medicina (Kaunas) 2022;59:44.36676668

## Substance Identification

### Substance Name

Succinylcholine

### CAS Registry Number

306-40-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Muscle Relaxants

Neuromuscular Depolarizing Agents